# Iohexol

CASRN: 66108-95-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of iohexol up to 45.3 grams (containing 21 grams of iodine) produce low levels in milk. In addition, because iohexol is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. The manufacturer states that withholding breastfeeding for 10 hours after administration to minimize the exposure of the infant; however, guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4]

### Drug Levels

Maternal Levels. Four mothers who were 1 week to 14 months postpartum received iohexol by rapid intravenous injection. Three received a dose of 50 mL (37.8 grams; 17.5 grams of iodine) and one received 60 mL (45.3 grams; 21 grams of iodine). Milk samples of 10 mL were collected 9 times over the 48 hours after the injection. The average iohexol milk concentration over the first 24 hours was 24.6 mg/L in the 3 women 1 week to 4 months postpartum and 130.5 mg/L in the one woman who was 14 months postpartum and weaning her infant. The authors calculated that the average amount of iohexol received by the first 3 infants over the first 24 hours would be 3.7 mg/kg or 0.5% of the weight-adjusted maternal dosage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A small for gestational age African-American infant was born at 36 weeks and 3 days. On the infant's fifth day of life, the mother underwent a contrast-enhanced imaging study using iohexol, after which the infant received breast milk from days 5 to 11. On day 11 of life, the neonate had an elevated thyroid-stimulating hormone and low free thyroxine levels, consistent with hypothyroidism. Urine iodine level in the infant was checked and found to be elevated. Because the thyroid alterations were thought to be transient, thyroid therapy was not given. The infant was ultimately found to have congenital thyroid dysgenesis with a genetic deletion in the gene RPS6KA3, consistent with Coffin–Lowry syndrome, and two other deletions.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate

### References

1 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120–1. https://www.acr.org/Clinical-Resources/Contrast-Manual
2 Webb JA, Thomsen HS, Morcos SK, et al. The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol 2005;15:1234–40.15609057
3 Chen MM, Coakley FV, Kaimal A, et al. Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol 2008;112:333–40.18669732
4 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210–e6.28937575
5 Nielsen ST, Matheson I, Rasmussen JN, et al. Excretion of iohexol and metrizoate in human breast milk. Acta Radiol 1987;28:523–6.2960342
6 Sasso E, Castaneda RLA, Linderer R, et al. Case report of breastfeeding after maternal iodine contrast: Neonatal hypothyroidism revealing an underlying congenital disorder. Int Breastfeed J 2026;21:34.41691276

## Substance Identification

### Substance Name

Iohexol

### CAS Registry Number

66108-95-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents